# Fluconazole

CASRN: 86386-73-4

## Drug Levels and Effects

### Summary of Use during Lactation

Fluconazole is acceptable in nursing mothers because amounts excreted into breastmilk are less than the neonatal fluconazole dosage.[1] Although no adequate clinical studies on fluconazole in Candida mastitis have been published, a survey of members of the Academy of Breastfeeding Medicine found that fluconazole is often prescribed for nursing mothers to treat breast candidiasis, especially with recurrent or persistent infections.[2] Treatment of the mother and infant simultaneously with fluconazole is often used when other treatments fail.[2-5] The most common maternal dosage regimen is 400 mg once, followed by 200 mg daily for at least 2 weeks or until pain is resolved,[6,7] although a study in Australia used a dose of 150 mg every other day until breast pain resolved.[8] The dosage of fluconazole in breastmilk with these maternal dosages is not sufficient to treat oral thrush in the infant.

### Drug Levels

Maternal Levels. A woman taking fluconazole 200 mg orally once daily for 18 days had a peak milk level of 4.1 mg/L 2 hours after the dose on day 20 postpartum. The half-life of elimination from breastmilk was 26.9 hours.[9]

A 12-week postpartum woman was given a single oral dose of fluconazole 150 mg. The highest milk levels were 2.9 and 2.7 mg/L at 2 and 5 hours after the dose. Milk fluconazole levels were 1.8 and 1 mg/L at 24 and 48 hours after the dose, respectively. The half-life in milk was about 30 hours.[10]

Using peak milk level data from these two patients, an exclusively breastfed infant whose mother was taking 200 mg daily of fluconazole would receive a maximum of about 0.6 mg/kg daily, which is 60% of the recommended neonatal (<2 weeks) dosage and 20% of the dosage used in older infants for oral thrush.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a study of fluconazole for treatment of lactation-associated thrush of the breasts, mothers took an average of 7.3 capsules (range 1 to 29 capsules) of 150 mg every other day until pain resolved. Seven of the 96 women reported side effects possibly caused by fluconazole in their breastfed infants. These included flushed cheeks, gastrointestinal upset, and runny or mucous stools.[8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Miconazole

### References

1 Kaplan YC, Koren G, Ito S, et al. Fluconazole use during breastfeeding. Can Fam Phys 2015;61:875-6.26759844
2 Brent NB. Thrush in the breastfeeding dyad: Results of a survey on diagnosis and treatment. Clin Pediatr (Phila) 2001;40:503-6.11583049
3 Bodley V, Powers D. Long-term treatment of a breastfeeding mother with fluconazole-resolved nipple pain caused by yeast: A case study. J Hum Lact 1997;13:307-11.9429366
4 Chetwynd EM, Ives TJ, Payne PM, et al. Fluconazole for postpartum candidal mastitis and infant thrush. J Hum Lact 2002;18:168-71.12033079
5 Betzold CM. Results of microbial testing exploring the etiology of deep breast pain during lactation: A systematic review and meta-analysis of nonrandomized trials. J Midwifery Womens Health 2012;57:353-64.22758357
6 Hanna L, Cruz SA. Candida mastitis: A case report. Perm J 2011;15:62-4.21505621
7 Heller MM, Fullerton-Stone H, Murase JE. Caring for new mothers: Diagnosis, management and treatment of nipple dermatitis in breastfeeding mothers. Int J Dermatol 2012;51:1149-61.22994661
8 Moorhead AM, Amir LH, O'Brien PW, et al. A prospective study of fluconazole treatment for breast and nipple thrush. Breastfeed Rev 2011;19:25-9.22263374
9 Schilling CG, Seay RE, Larson TA, et al. Excretion of fluconazole in human breast milk. Pharmacotherapy 1993;13:287. doi:10.1002/j.1875-9114.1993.tb02736.x
10 Force RW. Fluconazole concentrations in breast milk. Pediatr Infect Dis J 1995;14:235-6.7761190

## Substance Identification

### Substance Name

Fluconazole

### CAS Registry Number

86386-73-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents